# Erdafitinib

CASRN: 1346242-81-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of erdafitinib during breastfeeding. Because erdafitinib is 99.8% bound to plasma proteins, the amount in milk is likely to be low. However, its half-life is about 59 hours in adults and it might accumulate in the infant. The manufacturer recommends that breastfeeding be discontinued during erdafitinib therapy and for 1 month after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Erdafitinib

### CAS Registry Number

1346242-81-6

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors